# Prasugrel

CASRN: 389574-19-0

## Drug Levels and Effects

### Summary of Use during Lactation

No published information is available on the use of prasugrel during breastfeeding. It is rapidly converted to an active metabolite, which is 98% bound to plasma proteins, so it is unlikely that a clinically important amount is excreted into milk. Until more data become available, prasugrel should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. If it is used by a nursing mother, monitor the infant for bruising and bleeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspirin, Clopidogrel

## Substance Identification

### Substance Name

Prasugrel

### CAS Registry Number

389574-19-0

### Drug Class

Breastfeeding

Lactation

Milk, Human

Platelet Aggregation Inhibitors